# Magnesium Hydroxide

CASRN: 1309-42-8

## Drug Levels and Effects

### Summary of Use during Lactation

A study on the use of magnesium hydroxide during breastfeeding found no adverse reactions in breastfed infants. Intravenous magnesium increases milk magnesium concentrations only slightly. Oral absorption of magnesium by the infant is poor, so maternal magnesium hydroxide is not expected to affect the breastfed infant's serum magnesium. Magnesium hydroxide supplementation during pregnancy might delay the onset of lactation, but it can be taken during breastfeeding and no special precautions are required.

### Drug Levels

Maternal Levels. Ten women with pre-eclampsia were given 4 grams of magnesium sulfate intravenously followed by 1 gram per hour until 24 hours after delivery. While the average serum magnesium was 35.5 mg/L in treated women compared to 18.2 mg/L in 5 untreated controls, colostrum magnesium levels at the time of discontinuation of the infusion was 64 mg/L in treated women and 48 mg/L in the controls. By 48 hours after discontinuation, colostrum magnesium levels were only slightly above control values and by 72 hours they were virtually identical to controls.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Fifty mothers who were in the first day postpartum received 15 mL of either mineral oil or an emulsion of mineral oil and magnesium hydroxide equivalent to 900 mg of magnesium hydroxide, although the exact number who received each product was not stated. Additional doses were given on subsequent days if needed. None of the breastfed infants were noted to have any markedly abnormal stools, but all of the infants also received supplemental feedings.[2]

### Effects on Lactation and Breastmilk

One mother who received intravenous magnesium sulfate for 3 days for pregnancy-induced hypertension had lactogenesis II delayed until day 10 postpartum. No other specific cause was found for the delay, although a complete work-up was not done.[3] A subsequent controlled clinical trial found no evidence of delayed lactation in mothers who received intravenous magnesium sulfate therapy.[4] Some, but not all, studies have found a trend toward increased time to the first feeding or decreased sucking in infants of mothers treated with intravenous magnesium sulfate during labor because of placental transfer of magnesium to the fetus.[4,5]

A study in 40 pairs of matched healthy women with vaginally delivered singleton pregnancies, outcome endpoints were compared in those receiving continuous oral magnesium aspartate HCl supplementation mean dose of 459 mg daily (range 365 to 729 mg of magnesium daily) for at least 4 weeks before delivery versus non-supplemented controls. In the magnesium group, significantly fewer women could breastfeed their infants exclusively at discharge (63% vs 80%).[6]

### Alternate Drugs to Consider

Bisacodyl, Docusate, Psyllium, Sodium Picosulfate, Sodium Phosphate

### References

1 Cruikshank DP, Varner MW, Pitkin RM. Breast milk magnesium and calcium concentrations following magnesium sulfate treatment. Am J Obstet Gynecol 1982;143:685-8.7091241
2 Baldwin WF. Clinical study of senna administration to nursing mothers: Assessment of effects on infant bowel habits. Can Med Assoc J 1963;89:566-8.14045350
3 Haldeman W. Can magnesium sulfate therapy impact lactogenesis? J Hum Lact 1993;9:249-52.8260059
4 Riaz M, Porat R, Brodsky NL, Hurt H. The effects of maternal magnesium sulfate treatment on newborns: A prospective controlled study. J Perinatol 1998;18:449-54.9848759
5 Rasch DK, Huber PA, Richardson CJ, et al. Neurobehavioral effects of neonatal hypermagnesemia. J Pediatr 1982;100:272-6.7199083
6 Meier B, Huch R, Zimmermann R, von Mandach, U. Does continuing oral magnesium supplementation until delivery affect labor and puerperium outcome? Eur J Obstet Gynecol Reprod Biol 2005;123:157-61.15899543

## Substance Identification

### Substance Name

Magnesium Hydroxide

### CAS Registry Number

1309-42-8

### Drug Class

Breast Feeding

Lactation

Antacids

Cathartics

Gastrointestinal Agents

Magnesium Compounds

Minerals